# Nivolumab

CASRN: 946414-94-4

## Drug Levels and Effects

### Summary of Use during Lactation

Nivolumab milk levels in one mother were unexpectedly high and appeared to accumulate with repeated doses, possibly because it is an IgG_4_ antibody rather than the more typical IgG_1_ for other monoclonal antibodies It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[1] However, until more data become available, nivolumab should probably be avoided during breastfeeding, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be discontinued during nivolumab therapy and for 5 months after the last dose of the drug.

### Drug Levels

Maternal Levels. A mother with melanoma was started on intravenous nivolumab 480 mg every four weeks at 6 weeks post-partum. Seventy-two breast milk samples were collected over a 34-day period during the first and second cycles of therapy. A peak concentration of 157 mcg/L occurred on day 3 after the first dose, then after a decline in concentrations another increase in concentrations started at day 7 reaching a peak concentration of 503 mcg/L on day 13. The milk concentration at the time of the second dose on day 27 was about 175 mcg/L and the peak milk concentration of nivolumab at 7 days after the second dose was higher after the second dose. The authors speculated that nivolumab accumulation in milk could continue because of its long half-life.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
2 de Jong K, Damoiseaux D, Pluim D, et al. High accumulation of nivolumab in human breast milk: A case report. Biomed Pharmacother 2023;166:115354.37625324

## Substance Identification

### Substance Name

Nivolumab

### CAS Registry Number

946414-94-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Biological Response Modifiers

Immunologic Adjuvants

Immune Checkpoint Inhibitors

Antibodies, Monoclonal